# Castor

CASRN: 8001-79-4

## Drug Levels and Effects

### Summary of Use during Lactation

Castor (Ricinus communis) beans contain triglycerides, mostly consisting of ricinoleic acid esters, and small amounts of the toxic ricin and ricine. Pressing of the beans produces castor oil and purification of the oil eliminates the ricin and ricine. Castor oil is a strong stimulant laxative. Castor beans as well as a homeopathic preparation of castor purportedly reduce milk flow,[1] but it is also reportedly used as a galactogogue.[2-4] A poultice of castor leaves is also a purported galactogogue.[5,6] In some parts of India, castor oil is also reportedly applied to the breasts to stimulate lactation.[6] No scientifically valid clinical trials support any of these uses and some preparations may be toxic to the infant. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[7,8] No data exist on the excretion of any components of the castor plant or castor oil into breastmilk or on their safety and efficacy in nursing mothers or infants. However, little of the active ricinoleic acid is thought to be absorbed from the intestine. Because of a lack of information, other cathartics may be preferred in nursing mothers.

In traditional Indian culture, castor oil has been administered to newborn infants during the first 2 to 3 days of life, often resulting in adverse effects.[9,10] Administration of castor oil to newborns is dangerous and should be avoided.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In rural India, castor oil has been traditionally given to infants during the first 2 to 3 days of life to clear the intestine of meconium. This practice can result in paralytic ileus and aspiration pneumonia.[9] Severe hypoalbuminemia was also reported in a 1.5-month-old infant whose grandmother gave him castor oil daily from the fifth day of life, resulting in diarrhea and malnutrition.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Cathartic) Bisacodyl, Magnesium Hydroxide, Senna

### References

1 Hardy M. Women's health series: Herbs of special interest to women. J Am Pharm Assoc (Wash) 2000;40:234-42.10730024
2 Eglash A. Treatment of maternal hypergalactia. Breastfeed Med 2014;9:423-5.25361472
3 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317-8.22224508
4 Dandotiya H, Singh G, Kashaw S. The galactagogues use by Indian tribal communities to over come poor lactation. Int J Biotechnol Bioeng Res 2013;4:243-8. http://www.ripublication.com/Volume/ijbbrv4n3spl.htm
5 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93-100. doi:10.1089/act.1997.3.93
6 Rasiya B, A, Nayar T. Plants used for natal healthcare in folk medicine of Kerala, India. Indian J Tradit Knowl 2011;10:523-7.
7 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
8 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
9 Benakappa D, Raju M, Shivananda, et al. Breast-feeding practices in rural Karnataka (India) with special reference to lactation failure. Acta Paediatr Jpn 1989;31:391-8.2514560
10 Jayaprakash D, Raghu R, TS, Singh D, et al. Laxative induced hypoalbuminemia. Indian Pediatr 1995;32:1037-8.8935275

## Substance Identification

### Substance Name

Castor

### Scientific Name

Ricinus communis

### CAS Registry Number

8001-79-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cathartics

Complementary Therapies

Oils

Phytotherapy

Plants, Medicinal